# Sevelamer

CASRN: 52757-95-6

## Drug Levels and Effects

### Summary of Use during Lactation

Because sevelamer is not orally absorbed, sevelamer does not reach the breastmilk or adversely affect the breastfed infant after maternal administration. A suspension of sevelamer has been added directly to breastmilk to lower the phosphorus concentration of milk. This could be a useful maneuver for breastmilk use in infants with renal impairment; however, clinical use has not been reported. In addition to lowering average phosphorus content by 65% to over 80%, the calcium content of breastmilk was reduced by almost as much and the casein content also decreased somewhat. With sevelamer hydrochloride, the chloride content increased by 60% and the pH changed from 6.8 to 7.8, although pH appears to rebound over time.[1,2] Addition of large amounts of sevelamer to artificial formula also lowers the copper, magnesium, manganese, potassium, sulfur and zinc concentrations by about 20%.[3] Similar reductions might occur with breastmilk.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Ferrara E, Lemire J, Reznik VM, et al. (2004). Dietary phosphorus reduction by pretreatment of human breast milk with sevelamer. Pediatr Nephrol.
2 Raaijmakers R, Houkes LM, Schroder CH, et al. (2013). Pre-treatment of dairy and breast milk with sevelamer hydrochloride and sevelamer carbonate to reduce phosphate. Perit Dial Int.
3 Taylor JM, Oladitan L, Carlson S, et al. (2015). Renal formulas pretreated with medications alters the nutrient profile. Pediatr Nephrol.

## Substance Identification

### Substance Name

Sevelamer

### CAS Registry Number

52757-95-6

### Drug Class

Breast Feeding

Lactation

Chelating Agents